# Pegademase Bovine

CASRN: 130167-68-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of pegademase bovine during breastfeeding. Because it is a large protein molecule with a molecular weight of 113,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably partially destroyed in the infant's gastrointestinal tract and poorly absorbed orally. Polyethylene glycol is not excreted into breastmilk.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Clowse M, Förger F, Hwang C, et al. Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890-6.28814432

## Substance Identification

### Substance Name

Pegademase Bovine

### CAS Registry Number

130167-68-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy

Adenosine Deaminase